# Nipocalimab

CASRN: 2211985-36-1

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal nipocalimab injections produce low levels in colostrum and breastmilk. Because adalimumab is a large protein molecule, it is likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[1] Nipocalimab was undetectable in the serum of some breastfed infants. No special precautions appear to be required.

### Drug Levels

Maternal Levels. Thirteen pregnant participants delivered 12 live-born infants and one stillborn, a fetal loss due to intrauterine transfusion. Treatment was administered weekly from 14 to 35 weeks’ gestation. The dosage was initiated at 30 mg/kg baseline weight but was subsequently increased to 45 mg/kg. It was then modified again to 45 mg/kg of maternal weight assessed every 2 weeks. All 12 maternal participants had colostrum sampled between 0 and 3 days after birth and/or for breastmilk between 6 and 8 days after birth. All samples with detectable nipocalimab were collected from mothers who discontinued treatment less than 3 weeks before delivery (n = 5), whereas no nipocalimab was observed in colostrum or breastmilk from women who discontinued treatment more than 7 weeks before delivery (n = 7). Nipocalimab was detected in four of seven (57%) colostrum samples and two of nine (22%) breastmilk samples. In the four colostrum samples with detectable nipocalimab, 3 had concentrations less than 4 mg/L, below the threshold of 10 mg/L considered to be pharmacologically active, and 1 had a concentration of 68.4 mg/L. All breastmilk samples with detectable nipocalimab (n = 2) had concentrations less than 4 mg/L, When comparing colostrum with breastmilk samples across four maternal participants with both available colostrum and breastmilk samples, two showed low, pharmacologically inactive drug concentrations (1.35 and 3.66 mg/L) in colostrum and undetectable concentrations (< 0.01 mg/L ) in breastmilk. One maternal participant had an undetectable drug concentration in colostrum, but a low drug concentration (1.27 mg/L) in breastmilk. Another mother had a drug concentration of 68.4 mg/L in colostrum 2 days after delivery and 0.58 mg/L in breastmilk 8 days after delivery. This mother delivered on the day of the last nipocalimab administration and had a serum nipocalimab concentration of 1100 mg/L at delivery.[2]

Infant Levels. Twelve mothers received nipocalimab initiated at 30 mg/kg baseline weight, subsequently increased to 45 mg/kg and then modified to 45 mg/kg every 2 weeks. Nine of the 12 infants were breastfed and 5 had blood levels analyzed. At week 4 after birth, none of the 5 breastfed infants (including 2 who were breastfed by the mothers with the two highest colostrum nipocalimab concentrations) had detectable serum nipocalimab concentrations (<0.01 mg/L).[2]

### Effects in Breastfed Infants

Five infants were exposed to nipocalimab during pregnancy and postpartum in breastmilk. Their serum IgG levels decreased to nadir concentrations between 4 and 24 weeks after birth similar to the normal process of maternal IgG clearance in infancy, which is typically completed by approximately 24 weeks after birth and followed by endogenous IgG production. Infant vaccine responses that achieved protective titers to tetanus and diphtheria were observed in response to routine infant immunizations, except for one subthreshold diphtheria titer at 96 weeks after birth (∼20 months after the last vaccination).[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3 33956488
2 de Winter DP, Moise KJ, Ling LE, et al. Infant immunity after maternal nipocalimab in severe hemolytic disease of the fetus and newborn. NEJM Evid 2026;5:EVIDoa2500097

## Substance Identification

### Substance Name

Nipocalimab

### CAS Registry Number

2211985-36-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal, Humanized